# Epoprostenol

CASRN: 35121-78-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of epoprostenol during breastfeeding. The half-life of epoprostenol is 6 minutes or less. It is unlikely that clinically important amounts of epoprostenol are excreted into milk and absorbed by the breastfed infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Epoprostenol

### CAS Registry Number

35121-78-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Prostaglandins, Synthetic

Vasodilator Agents